# Dapagliflozin

CASRN: 461432-26-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of dapagliflozin during breastfeeding. Dapagliflozin is an uncharged molecule that is 91% protein bound in plasma, so it is unlikely to pass into breastmilk in clinically important amounts. The manufacturer does not recommend dapagliflozin during breastfeeding because of a theoretical risk to the infant's developing kidney. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acarbose (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1/), Colesevelam (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM516/), Glipizide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM127/), Glyburide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM128/), Insulin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM147/), Metformin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM173/), Miglitol (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM407/), Semaglutide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/), Tirzepatide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/)

## Substance Identification

### Substance Name

Dapagliflozin

### CAS Registry Number

461432-26-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Sodium-Glucose Cotransporter 2 Inhibitors

SGLT2 Inhibitors